# Peginterferon Beta

CASRN: 1211327-92-2

## Drug Levels and Effects

### Summary of Use during Lactation

After a standard subcutaneous dose of peginterferon beta-1a, the amount of peginterferon beta 1a in milk is miniscule. In addition, because interferon is poorly absorbed orally, it is not likely to reach the bloodstream of the infant. Polyethylene glycol is not excreted into breastmilk.[1] Many women have breastfed while taking conventional interferon beta-1a and a few with peginterferon beta-1a with no adverse infant effects reported. The Multiple Sclerosis Centre of Excellence on Reproduction and Child Health considers interferon beta to be "moderately safe" to use during breastfeeding,[2] and a French consensus group of neurologists concluded that interferon beta can be used during breastfeeding.[3] No special precautions appear to be required during breastfeeding while using peginterferon beta.

### Drug Levels

Maternal Levels. Five breastfeeding women with multiple sclerosis who had weaned their infants began receiving peginterferon beta-1a subcutaneous injection at a median of 29.6 weeks postpartum. Patients collected a baseline breastmilk sample prior to treatment initiation and daily breastmilk samples on days 1 to 14 after a 125 mcg dose to measure intact peginterferon beta-1a. The peginterferon beta-1a concentration in breastmilk at baseline was below detectable levels. The highest breastmilk concentration recorded was 126.2 ng/L in one patient on day 6 after the dose. All of the other mothers had peak milk levels below 72 ng/L. Mean breast milk concentrations were 47.1, 40.9, 54.8, 65.7, 42.8, 38.2, and 27.4 ng/L on days 2, 4, 6, 8, 10, 12, and 14, respectively. Most breast milk samples had undetectable concentrations of peginterferon beta-1a (<15 mcg/L) from day 8 to day 14. The geometric mean peak concentration was 48.9 ng/L and the median time to the peak was 4 days. The mean breastmilk concentration across all study days was 35.95 ng/L. The authors estimated that a fully breastfed infant would receive a total of 0.019% of the maternal weight-adjusted dosage over a two-week dosage interval.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Six women had been receiving interferon beta-1a (Avonex, Biogen) 30 mcg intramuscularly once weekly for multiple sclerosis for months to years. None of the mothers noticed any adverse effects in their breastfed infants.[5]

A woman received interferon beta-1b (Betaferon, BayerHealthCare; dosage unspecified) for multiple sclerosis throughout pregnancy. She continued the drug while she exclusively breastfed her infant. At 5 months of age, the infant was monitored regularly by a physician and was developing well with no abnormalities.[6]

One mother received interferon beta-1a for multiple sclerosis during pregnancy and postpartum. All of their infants were exclusively breastfed for 6 months and no noticeable problems were reported in any of them.[7]

In data collected from 4 countries, 17 women received interferon and 41 women received glatiramer during pregnancy and postpartum for treatment of multiple sclerosis. Of these, 63% breastfed (extent not stated) their infants for a mean of 8.8 months. No mention was made of adverse reactions in breastfed infants.[8]

Thirty-nine women with multiple sclerosis who were treated with interferon beta-1a during breastfeeding were followed by the German Multiple Sclerosis and Pregnancy Registry. During breastfeeding, the drug was administered every other day (n = 8), 3 times a week (n = 15), or once a week (n = 12). In addition, one woman receive peginterferon beta-1a every 2 weeks, and in 3 additional women, the frequency was not known. One woman received both interferon beta-1a every other day and glatiramer daily. Most infants were also exposed during pregnancy. Infants were breastfed for an average of 9.2 months (range 1.6 to 28.5 months) during interferon therapy. Infants were followed for 1 year and most developed normally; the percentages of infants with developmental delay, courses of antibiotics and hospitalizations did not differ from the reference German population. No conditions attributable to interferon beta-1a were found.[9]

A single-center study in Germany enrolled 426 women taking beta-interferon or peginterferon-beta during pregnancy who delivered 466 infants. Of these, 158 infants were breastfed, 112 exclusively until month 5 postpartum. In total, 34 of the 158 infants (21.5%) were breastfed while the mother was taking interferon. Seven infants were breastfed up to one week, 11 were breastfed over 1 week and up to 2 months, 10 were breastfed over 2 months and up to 6 months, and 6 were breastfed over 6 months and up to 12 months. In the peginterferon beta-1a group, a higher percentage stopped breastfeeding under interferon exposure within the first month after childbirth compared to the interferon beta-1a group (68.8% vs. 22.2%). Preliminary analyses did not indicate any differences in the development of weight, length, and head circumference between exposed and unexposed subgroups during breastfeeding, but the analysis was not adequately powered to reliably detect or exclude differences.[10]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Glatiramer, Immune Globulin, Interferon Beta, Methylprednisolone

### References

1 Clowse ME, Förger F, Hwang C, et al. Minimal to no transfer of certolizumab pegol into breast milk: Results from CRADLE, a prospective, postmarketing, multicentre, pharmacokinetic study. Ann Rheum Dis 2017;76:1890-6.28814432
2 Bove R, Alwan S, Friedman JM, et al. Management of multiple sclerosis during pregnancy and the reproductive years: A systematic review. Obstet Gynecol 2014;124:1157-68.25415167
3 Bodiguel E, Bensa C, Brassat D, et al. Multiple sclerosis and pregnancy. Rev Neurol (Paris) 2014;170:247-65.24684929
4 Houtchens M, Mahlanza T, Ciplea AI, et al. Peginterferon beta-1a concentrations in breast milk of lactating multiple sclerosis patients. Mult Scler Relat Disord 2022;60:103700.35263702
5 Hale TW, Siddiqui AA, Baker TE. Transfer of interferon beta-1a into human breastmilk. Breastfeed Med 2012;7:123-5.21988602
6 Rockhoff M, Hellwig K. Family planning and interferon (beta)-1b - A case report of successful hormonal stimulation, pregnancy and breast-feeding under interferon (beta)-1b. Aktuelle Neurologie 2012;39 (Suppl 1):S49-S51. doi:10.1055/s-0032-1304879
7 Hellwig K, Gold R. Glatiramer acetate and interferon-beta throughout gestation and postpartum in women with multiple sclerosis. J Neurol 2011;258:502-3.20878174
8 Fragoso YD, Boggild M, Macias-Islas MA, et al. The effects of long-term exposure to disease-modifying drugs during pregnancy in multiple sclerosis. Clin Neurol Neurosurg 2013;115:154-9.22633835
9 Ciplea AI, Langer-Gould A, Stahl A, et al. Safety of potential breast milk exposure to IFN-beta or glatiramer acetate: One-year infant outcomes. Neurol Neuroimmunol Neuroinflamm 2020;7:e757.32434802
10 Klehmet J, Begus-Nahrmann Y, Taipale K, et al. Impact of interferon beta exposure on birth outcome and child development - Results from the post-authorisation safety study PRIMA. Mult Scler Relat Disord 2023;77:104844.37393802

## Substance Identification

### Substance Name

Peginterferon Beta

### CAS Registry Number

1211327-92-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunologic Adjuvants

Biological Response Modifiers